# Desogestrel

CASRN: 54024-22-5

## Drug Levels and Effects

### Summary of Use during Lactation

Desogestrel is only available in the United States in combination oral contraceptive products containing 150 mcg of desogestrel and 30 mcg of ethinyl estradiol. Expert opinion holds that the risks of progestin-only contraceptive products usually are acceptable for nursing mothers at any time postpartum.[1,2] For further information, consult the record entitled, Contraceptives, Oral, Combined.

### Drug Levels

Desogestrel is metabolized in the body to the active metabolite, etonogestrel.

Maternal Levels. Ten women participating in a study of desogestrel 75 mcg daily as a progestin-only contraceptive had blood and milk samples taken multiple times after taking a single tablet at the end of 1 and 4 treatment cycles. Peak etonogestrel concentrations in milk were not significantly different: 0.2 picograms/L at 6 hours after the dose and 0.3 picograms/L at 5.2 hours after the dose at 1 and 4 months, respectively. An exclusively breastfed infant would receive an average of 15 to 22 ng/kg daily of etonogestrel, which is 1.2 to 1.7% of the maternal weight-adjusted dosage.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A nonblinded, nonrandomized study compared oral desogestrel 75 mcg alone daily (n = 42) to an intrauterine device (IUD; n = 40) begun 28 to 56 days postpartum for contraception. No differences in infant length, weight or biparietal head circumferences were found after 1, 4, and 7 treatment cycles. Temporary breast enlargement was reported in 2 infants and increased sweating was reported in 1 infant in the desogestrel group, compared with no adverse effects reported in infants in the IUD group. The growth of some infants were again measured at 1.5 and 2.5 years; no clinically important differences were found.[3]

A breastfed (extent not stated) infant developed scrotal hair at 4 months of age. His mother had received the progestin, dydrogestrone, during the first trimester of pregnancy and began taking desogestrel 0.075 mg daily as a contraceptive beginning at 3 months postpartum. His mother discontinued desogestrel after 28 days and the scrotal hair resolved by 11 months of age. Desogestrel was a possible contributing cause of scrotal hair growth in this infant.[4]

### Effects on Lactation and Breastmilk

A nonblinded, nonrandomized study compared oral desogestrel 75 mcg alone daily (n = 42) to an intrauterine device (n = 40) begun 28 to 56 days postpartum for contraception. During the 7-month trial period, 1 woman dropped out of the trial because of diminished lactation compared with none in the IUD group. At the end of the first and fourth treatment cycle, there were no differences in the amount of milk produced between the desogestrel and IUD groups. No differences in triglyceride, protein or lactose content of milk were found at the end of 1, 4, and 7 cycles of therapy.[3]

A nonrandomized study followed 200 women given a desogestrel-only contraceptive 75 mcg daily for 6 months beginning at 6 weeks postpartum and compared them to 200 women who received placebos. No difference was found in the amounts of milk production or infant growth and development between the two groups.[5]

In a nonblinded, nonrandomized study in Türkiye of 4964 postpartum women were given the option of desogestrel 75 mcg (Cerazette) as a contraceptive starting at 21 days postpartum. On follow-up, the percentages of women who were breastfeeding at the third, sixth and ninth months postpartum were 68.4%, 54.8% and 58.5%, respectively. The authors concluded that the contraceptive had no negative impact on breastfeeding.[6]

### Alternate Drugs to Consider

Etonogestrel, Intrauterine Copper Contraceptive, Oral Levonorgestrel, Intrauterine Levonorgestrel, Levonorgestrel Implant, Medroxyprogesterone Acetate, Norethindrone, Progesterone

### References

1 World Health Organization. Medical Eligibility Criteria For Contraceptive Use: Sixth Ed. 2025. https://www.who.int/publications/i/item/9789240115583
2 Nguyen AT, Curtis KM, Tepper NK, et al. U.S. Medical Eligibility Criteria for Contraceptive Use, 2024. MMWR Recomm Rep 2024;73:1–126.39106314
3 Bjarnadóttir RI, Gottfredsdóttir H, Sigurdardóttir K, et al. Comparative study of the effects of a progestogen-only pill containing desogestrel and an intrauterine contraceptive device in lactating women. BJOG 2001;108:1174–80.11762658
4 Janus D, Wojcik M, Tyrawa K, et al. Transient isolated scrotal hair development in infancy. Clin Pediatr (Phila) 2013;52:628–32.23482727
5 Dutta DK, Dutta I. Desogestrel mini pill: Is this safe in lactating mother? J Indian Med Assoc 2013;111:553–5.24783396
6 Dilbaz B, Bülbül M, Dilbaz S, et al. The efficacy, acceptability and continuation of postpartum, post-abortive progestin-only pill: A pioneering prospective multicentric study from Turkey. J Turk Ger Gynecol Assoc 2022;23:255–62.34100574

## Substance Identification

### Substance Name

Desogestrel

### CAS Registry Number

54024-22-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contraceptive Agents, Female

Contraceptives, Oral, Synthetic